# Lanthanum Carbonate

CASRN: 54451-24-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of lanthanum carbonate during breastfeeding in humans. In animal studies, lanthanum was deposited in the bones of juvenile animals. Lanthanum carbonate should not be used in nursing mothers. An alternate drug is recommended.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aluminum Hydroxide, Calcium Acetate, Calcium Carbonate, Ferric Citrate, Sevelamer, Sucroferric Oxyhydroxide

## Substance Identification

### Substance Name

Lanthanum Carbonate

### CAS Registry Number

54451-24-0

### Drug Class

Breast Feeding

Lactation

Milk, Human